# Goat’s Rue

CASRN: 84650-07-7

## Drug Levels and Effects

### Summary of Use during Lactation

Goat’s rue (Galega officinalis) leaves and flowering tops contain numerous guanidine derivatives, including galegine which may cause hypoglycemia. Goat’s rue is widely used internationally as a galactogogue.[1-4] No scientifically valid clinical trials support this use, although some old, poorly controlled studies found an effect. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[5,6] Although it has a long history of use as a galactogogue, very limited scientific data exist on the safety and efficacy of goat’s rue in nursing mothers or infants. In general, goat’s rue is well tolerated, but it might cause hypoglycemia, so caution should be used in women taking antidiabetic drugs. Diarrhea and hepatomegaly occurred in a woman taking fennel, fenugreek, and goat’s rue as galactogogues, and slightly elevated transaminases occurred in a woman taking goat’s rue, torbangun, and fenugreek that reversed when goat’s rue and torbangun were discontinued.[7,8]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two breastfed infants, aged 15 and 20 days, were admitted to the hospital for a reported lack of weight gain in the previous 7 to 10 days, caused by “difficult feeding”. The parents reported restlessness and vomiting during the past day. One of the mothers also reported feeling drowsy and weak. On examination, the infants were afebrile but had hypotonia, lethargy, emesis, weak cry, poor sucking and weak responses to painful stimuli. Infant laboratory values, electrocardiograms and blood pressures were normal, and septic work-ups were negative. Both mothers had both been drinking more than 2 liters daily of an herbal tea mixture reportedly containing licorice, fennel, anise, and goat’s rue to stimulate lactation. After the mothers discontinued breastfeeding and the herbal tea, the infants improved within 24 to 36 hours. Symptoms of the affected mother resolved rapidly after discontinuing the herbal tea. After 2 days, breastfeeding was reinstituted with no further symptoms in the infants. Both infants were doing well at 6 months of age. The authors attributed the maternal and infant symptoms to anethole, which is found in both anise and fennel, but not goat’s rue; however, the anethole levels were not measured in breastmilk, nor were the teas tested for their content.[9]

### Effects on Lactation and Breastmilk

A group of 5 nursing mothers were given no herb for 5 days, 15 mL of a 5% of goat’s rue infusion orally 3 times daily for 10 days, followed by another 5-day control period from days 15 to 20. Their diet and environment were kept constant during the study period. Milk volume was measured daily and milk fat percentage was measured on days 5, 10, 15 and 20. The goat’s rue had no effect on milk volume or fat content.[10] Because of the lack of randomization, blinding and controls, and small number of participants, no valid conclusion can be made from this study on the galactogogue effects of goat’s rue.

Goat’s rue extract (Galegran, Rieswerke, [Graz, Austria]) was given in an unspecified dose to increase the milk supply in an old, uncontrolled observational study of 336 women whose milk production was thought to be lower than normal. Increased milk output of 30 to 60% was observed.[11] Because of the lack of randomization, breastfeeding support, and placebo control no valid conclusion can be made from this study on the galactogogue effects of goat’s rue.

In another old study that was not blinded, randomized or placebo controlled, goat’s rue extract (Galegran, Rieswerke, [Graz, Austria]) was given in an unspecified dose to 50 postpartum women from the third to fifth days postpartum. Fifty untreated women were used as comparators. The milk output increased by 75% in the untreated women and by 125% in the treated women, but the volumes of milk were spread over wide ranges. Also, the quality of milk was determined based on the dry weight values of fat, protein and lactose in another 100 women (50 treated and 50 untreated). The increase in milk resulted in a proportional increase in the tested components; however, the differences were all in the normal range and not statistically significant.[12] Similar to the above study, no valid conclusion can be made from this study on the galactogogue effects of goat’s rue.

Sixty-six postpartum mothers (22 in each of 3 groups) with no concurrent illnesses were randomly assigned to receive an herbal tea, placebo, or nothing after delivering healthy, fullterm infants. Mothers in the herbal tea group received at least 3 cups daily of 200 mL of Still Tea (Humana-Istanbul, Türkiye; containing hibiscus 2.6 grams, fennel extract 200 mg, fennel oil 20 mg, rooibos 200 mg, verbena [vervain] 200 mg, raspberry leaves 200 mg, fenugreek 100 mg, goat’s rue 100 mg, and vitamin C 500 mg per 100 grams, per manufacturer’s web site November 2011). A similar-looking apple tea was used as the placebo. All women were followed by the same nurse and pediatrician who were blinded to what treatment the mothers received. Mothers who received the Still Tea produced more breastmilk with an electric breast pump on the third day postpartum than mothers in the other groups. The infants in the Still Tea group had a lower maximum weight loss, and they regained their birth weights sooner than those in the placebo or no treatment arms. No long-term outcome data were collected. Because many of the ingredients in Still Tea are purported galactogogues, including goat’s rue, no single ingredient can be considered solely responsible for the tea’s effects, although the authors attributed the action to fenugreek.[13]

An herbal tea containing goat’s rue, fenugreek, hibiscus, fennel, rooibos, vervain, raspberry, and vitamin C (Humana Still-Tee, Humana GmbH, Herford, Germany) or water was randomly given to nursing mothers in a dosage of 3 cups daily beginning on the day of delivery. Several markers of antioxidant capacity were measured in breastmilk on day 1 and again after 7 to 10 days. No difference was found in the markers between mothers who received the tea and the water.[14]

In a randomized, double blinded study, a placebo or galactogogue containing 5 grams of a mixture of silymarin-phosphatidylserine and Galega (goat’s rue) in a commercial product (Piulatte Plus, Milte) was given once daily to mothers of preterm infants. Phosphatidyl serine purportedly has improved bioavailability over silymarin alone. The placebo group received 5 grams of lactose once daily. The medication or placebo was given from day 3 to day 28 postpartum. Mothers pumped using a breast pump every 2 to 3 hours during the day and as desired at night. Milk production was measured on days 7, 14 and 28 postpartum. Daily milk production averaged 200 mL in the treated group and 115 mL in the control group. The total amount of milk produced during the study period and the proportion of women producing more than 200 mL daily was greater in the treated group than controls on days 7 and 28.[15] Mothers were contacted at 3 and 6 months postpartum concerning breastmilk production. Of the 89 mothers who responded satisfactorily at 3 months, more mothers who had received silymarin-galega were exclusively breastfeeding than those who received placebo (22/50 vs 12/50). Also, more mothers were feeding more than 50% breastmilk to their infants in the treatment group than the placebo group (29/50 vs 18/50). At 6 months postpartum, more mothers were feeding more than 50% breastmilk to their infants in the treatment group than the placebo group (22/50 vs 12/50). These differences were statistically significant.[16]

A survey was conducted on 238 mothers in Italy who were using a commercial goat’s rue supplement that also contained vitamins and magnesium (Lactogal Plus, Loacker-Remedia, Italy) as a galactogogue. Sixty-seven percent of mothers felt there was an increase in milk production and 88% felt that the product had benefited the breastfeeding experience. Ninety-nine percent of mothers rated the tolerability as good or very good.[17] No actual measurements of breastmilk production were performed.

A randomized trial assigned mothers of preterm infants to receive either a purported herbal galactogogue tea twice daily, a fruit tea twice daily or nothing. The galactogogue tea mixture (Natal, Hipp [Türkiye]) contained 1% stinging nettle as well as melissa, caraway, anise, fennel, goat’s rue, and lemon grass in unspecified amounts. All mothers received similar breastfeeding advice from the same nurse, and two groups were told that the tea would increase milk production, but compliance with the study teas was not assessed. Mother used breast pumps to extract and measure their milk and output on day 1 and day 7 of the study were compared. Although the increase in volume of extracted milk was greater in the galactogogue tea group, there was no difference in maternal serum prolactin between the groups at 7 days. No difference in infant weight gain was seen between groups, although the authors stated that additional supplementation was provided to all infants in addition to the pumped milk.[18] The study was not blinded, the randomization method was not stated, intent-to-treat analysis was not performed, and some of the numerical results were internally inconsistent, so the quality of the study was poor.

A systematic review of randomized, controlled studies in the mothers of preterm neonates examined the efficacy of various herbal galactogogues in increasing milk supply. The authors concluded that a commercial product (Piùlatte®) containing silymarin with phosphatidylserine and galega produced a large increase in milk volume on day 4 postpartum, but low certainty evidence that it increases milk volume at day 7.[19]

### References

1 Hardy ML. Women’s health series: Herbs of special interest to women. J Am Pharm Assoc (Wash) 2000;40:234-42.10730024
2 Low Dog T. The use of botanicals during pregnancy and lactation. Altern Ther Health Med 2009;15:54-8.
3 Abascal K, Yarnell E. Botanical galactagogues. Altern Complement Ther 2008;14:288-94. doi: 10.1089/act.2008.14602.
4 Winterfeld U, Meyer Y, Panchaud A, . Management of deficient lactation in Switzerland and Canada: A survey of midwives’ current practices. Breastfeed Med 2012;7:317-8.22224508
5 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
6 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
7 Şahin B, Kaymaz N, Yıldırım S. Herbal remedies for perceived inadequate milk supply are perhaps not as safe as women think: A brief case report. Women Birth 2016;29:e133.27396295
8 Derdikman Ofir Y, Eglash A, Moberg KU, . Breastfeeding in panhypopituitarism: A case report, review of the literature, and management checklist. Int Breastfeed J 2026;30:923-33.
9 Rosti L, Nardini A, Bettinelli ME, . Toxic effects of a herbal tea mixture in two newborns. Acta Paediatr 1994;83:683.7919774
10 Nikolov P, Avramov NR. Investigations on the effect of Foeniculum vulgare, Carum carvi, Anisum vulgare, Crataegus oxyacanthus, and Galga officinalis on lactation. Izv Meditsinskite Inst Bulg Akad Naukite Sofia Otd Biol Meditsinski Nauki 1951;1:169-82.14888359
11 Typl H. The galactogogue effect of Galega officinalis. Zentralbl Gynakol 1961;83:713-6.13778893
12 Heiss H. Clinical and experimental contribution on the question of the lactogenic effect of Galega officinalis. Wien Med Wochenschr 1968;118:546-8.5751861
13 Turkyılmaz C, Onal E, Hirfanoglu IM, . The effect of galactagogue herbal tea on breast milk production and short-term catch-up of birth weight in the first week of life. J Altern Complement Med 2011;17:139-42.21261516
14 Kavurt S, Bas AY, Yucel H, . The effect of galactagogue herbal tea on oxidant and anti-oxidant status of human milk. J Matern Fetal Neonatal Med 2013;26:1048-51.23363373
15 Zecca E, Zuppa AA, D’Antuono A, . Efficacy of a galactogogue containing silymarin-phosphatidylserine and galega in mothers of preterm infants: A randomized controlled trial. Eur J Clin Nutr 2016;70:1151-4.27245206
16 Serrao F, Corsello M, Romagnoli C, . The long-term efficacy of a galactagogue containing silymarin-phosphatidylserine and Galega on milk production of mothers of preterm infants. Breastfeed Med 2018;13:67-9.29148822
17 Salatino S, Giacomelli L, Carnevali I, . The role of natural galactagogues during breast feeding. Focus on a Galega officinalis based food supplement. Minerva Pediatr 2017;69:531-7.27901335
18 Özalkaya E, Aslandogdu Z, Ozkoral A, . Effect of a galactagogue herbal tea on breast milk production and prolactin secretion by mothers of preterm babies. Niger J Clin Pract 2018;21:38-42.29411721
19 Cragg A, Levene I, Darabi S, . Herbal galactagogues to improve breastmilk production and lactation in mothers of preterm babies: A systematic review of clinical trials. Eur J Clin Nutr 2026;80:146-58.41350450

## Substance Identification

### Substance Name

Goat’s Rue

### Scientific Name

Galega officinalis

### CAS Registry Number

84650-07-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal